# Lepirudin

CASRN: 138068-37-8

## Drug Levels and Effects

### Summary of Use during Lactation

Lepirudin is no longer marketed in the United States. Limited information indicates that lepirudin in doses up to 100 mg daily produce very low levels in milk. Because of its large molecular weight, it would not be expected to be absorbed from breastmilk by the infant. Lepirudin would not be expected to cause any adverse effects in breastfed infants, especially if the infant is older than 2 months.[1]

### Drug Levels

Maternal Levels. One mother who was 10 weeks postpartum received lepirudin 50 mg twice daily subcutaneously. Her breastmilk had undetectable (<0.1 mg/L) lepirudin levels 3 hours after a dose.[2]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

One infant was breastfed for 3 months during therapeutic lepirudin use beginning at 7 weeks of age. No bleeding events occurred.[2]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Acenocoumarol, Dalteparin, Enoxaparin, Heparin, Rivaroxaban, Warfarin

### References

1 Bates SM, Rajasekhar A, Middeldorp S, et al. (2018). American Society of Hematology 2018 guidelines for management of venous thromboembolism: Venous thromboembolism in the context of pregnancy. Blood Adv.
2 Lindhoff-Last E, Willeke A, Thalhammer C, et al. (2000). Hirudin treatment in a breastfeeding woman. Lancet.

## Substance Identification

### Substance Name

Lepirudin

### CAS Registry Number

138068-37-8

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anticoagulants

Antithrombins